# Loracarbef

CASRN: 76470-66-1

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Although no information is available on the use of loracarbef during breastfeeding, beta-lactam antibiotics are generally not be expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with beta-lactams, but these effects have not been adequately evaluated. Loracarbef is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Cefprozil

## Substance Identification

### Substance Name

Loracarbef

### CAS Registry Number

76470-66-1

### Drug Class

- Breast Feeding
- Lactation
- Anti-Infective Agents
- Antibacterial Agents
- Carbacephems